# Apomorphine

CASRN: 58-00-4

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of apomorphine during breastfeeding. If apomorphine is required by the mother, it is not a reason to discontinue breastfeeding. However, apomorphine inhibits prolactin release in animals and might interfere with establishment of lactation. An alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Apomorphine

### CAS Registry Number

58-00-4

### Drug Class

Breastfeeding

Lactation

Milk, Human

Antiparkinson Agents

Dopamine Agents

Dopamine Agonists

Emetics

Gastrointestinal Agents